# Filgrastim

CASRN: 121181-53-1

## Drug Levels and Effects

### Summary of Use during Lactation

Filgrastim in the pharmaceutical name for granulocyte colony-stimulating factor (G-CSF). Pegfilgrastim is the long-acting form of filgrastim. Eflapegrastim and efbemalenograstim alfa are closely related G-CSF analogues. The excretion of exogenous G-CSF into breastmilk or its effects on breastfed infants have not been well studied. Limited data indicate that filgrastim and a similar G-CSF product, lenograstim, are poorly excreted into breastmilk and are undetectable by 3 days after an injection. Some authors recommend withholding breastfeeding for this period of time.[1] However, filgrastim has been safely given orally to neonates and is not orally absorbed by neonates, so any filgrastim that is excreted into milk is unlikely to adversely affect the breastfed infant.

### Drug Levels

Granulocyte colony-stimulating factor (G-CSF) is a normal component of breastmilk. In the United States, the biosynthetic forms that are available for exogenous administration are filgrastim and pegfilgrastim. Other biosynthetic forms of G-CSF are available in other countries. Lenograstim is a glycosylated recombinant G-CSF whereas filgrastim is not glycosylated.

Maternal Levels. A nursing mother who was 4 months postpartum was given the recombinant G-CSF product lenograstim in order to donate peripheral blood stem cells. She was given lenograstim subcutaneously in doses of 300 mcg on day 1,600 mcg daily on days 2 to 4 and 300 mcg daily on days 5 and 6 of therapy. G-CSF concentration in milk was less than 5 ng/L before therapy. G-CSF milk levels increased during therapy with levels of about 58 ng/L on day 4, 78 ng/L on day 5, and 85.7 ng/L on day 6. Sampling times were not stated.[2] The maximum amount in milk represents an infant dosage of about 0.013 mcg/kg which is 13% of an infant subcutaneous dose of exogenous G-CSF and 0.13% of the maternal weight-adjusted dosage.

A woman received subcutaneous injections of filgrastim in the following doses: 600 mcg on day 1,300 mcg twice daily on days 2 to 5, and 300 mcg once on day 6 prior to harvesting white cells for donation. She was nursing her 25-day-old infant and milk G-CSF levels were measured once daily just before the first dose of the day. G-CSF was first detectable (>10 ng/L) in whole milk 12 hours after the start of the regimen, had a peak milk concentration of 188 ng/L at 22 hours after the start of the regimen, and then after 43 hours, slowly declined until G-CSF was undetectable (<10 ng/L) in breastmilk 70 hours after the last dose.[3]

A patient received granulocyte colony stimulating factor (presumably filgrastim) for hematopoietic progenitor cell mobilization prior to transplantation. The exact dosage and regimen were not stated in the published abstract. The peak concentration of G-CSF in donor milk was at 592 ng/L 48 hours after the first dose. G-CSF remained detectable in donor milk for 48 hours after the final dose.[4]

Infant Levels. Published information on absorption of filgrastim from breastmilk was not found as of the revision date. However, a study in which an oral dose of 100 mcg/kg of filgrastim (10 times the subcutaneous dose) was given to preterm infants found that filgrastim was not absorbed.[5]

### Effects in Breastfed Infants

The manufacturer reports that there are a few case reports describing the use of filgrastim in breastfeeding mothers with no adverse effects noted in the infants.

Oral filgrastim 20 mcg daily for 5 days has been given to preterm infants with stage I necrotizing enterocolitis (NEC). Filgrastim appeared to halt progression to more severe stages of NEC in this small study.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pessach I, Shimoni A, Nagler A. Granulocyte-colony stimulating factor for hematopoietic stem cell donation from healthy female donors during pregnancy and lactation: what do we know? Hum Reprod Update 2013;19:259-67.23287427
2 Shibata H, Yamane T, Aoyama Y, . Excretion of granulocyte colony-stimulating factor into human breast milk. Acta Haematol 2003;110:200-1.14663166
3 Kaida K, Ikegame K, Fujioka T, . Kinetics of granulocyte colony-stimulating factor in the human milk of a nursing donor receiving treatment for mobilization of the peripheral blood stem cells. Acta Haematol 2007;118:176-7.17914246
4 Nelson RC. Granulocyte colony-stimulating factor (G-CSF) in breastmilk of a nursing donor during hematopoietic progenitor cells (HPC) mobilization. Transfusion 2018;58 (Suppl S2):169A. doi:10.1111/trf.14903
5 Calhoun DA, Maheshwari A, Christensen RD. Recombinant granulocyte colony-stimulating factor administered enterally to neonates is not absorbed. Pediatrics 2003;112:421-3.12897302
6 Canpolat FE, Yurdakok M, Korkmaz A, . Enteral granulocyte colony-stimulating factor for the treatment of mild (stage I) necrotizing enterocolitis: a placebo-controlled pilot study. J Pediatr Surg 2006;41:1134-8.16769348

## Substance Identification

### Substance Name

Filgrastim

### CAS Registry Number

121181-53-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Colony-Stimulating Factors

Hematopoietic Cell Growth Factors

Immunologic Factors